# Flecainide

CASRN: 54143-55-4

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal doses of flecainide up to 200 mg daily produce low levels in milk and undetectable infant serum levels. Flecainide is not expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.

### Drug Levels

Maternal Levels. In one mother taking flecainide 100 mg twice daily orally, milk flecainide levels were 0.89 and 1.09 mg/L at 3 hours after the mother’s second dose of the day on days 5 and 7 postpartum, respectively.[1] Assuming the measured levels are approximately peak levels, the amounts in milk represent a maximum infant dosage of about 4.5% of the maternal weight-adjusted dosage.

Eleven healthy volunteer women were given flecainide 100 mg twice daily orally (average 3.2 mg/kg daily) for 5.5 days after delivery. Flecainide levels in 24-hour pooled milk samples averaged 0.756 mg/L (range 0.13 to 1.53 mg/L) among the 11 women on day 5 when steady state had been attained. This corresponds to an average infant dosage of 3.6% (range 0.7 to 6.9%) of the maternal weight-adjusted dosage. After the last dose, the half-life of flecainide in breastmilk averaged 14.7 hours.[2]

A woman with ventricular arrhythmia was treated with flecainide 87.3 mg twice daily during pregnancy and postpartum. Breastmilk levels of flecainide ranged from 0.55 to 0.99 mg/L at 8 time points over the first 2 months postpartum. Using the highest milk level the authors estimated the worst case dose that that the infant would receive would be 0.15 mg/kg daily or 5.6% of the mother’s weight-adjusted dosage and 7.5% of an infant flecainide dosage.[3]

A woman was maintained on flecainide 200 mg daily throughout pregnancy and postpartum. Random milk flecainide concentrations at 5, 7 and 30 days postpartum were 1.7, 1.2 and 1.27 mg/L, respectively. The RID was estimated to range from 7.7 to 8.8% on those days.[4]

Infant Levels. A woman with ventricular arrhythmia was treated with flecainide 87.3 mg twice daily during pregnancy and postpartum and exclusively breastfed her infant. At delivery, the infant’s flecainide blood level was 0.26 mg/L, probably as a result of placental transfer. On 5 additional occasions from 10 days to 6 months of age, infant flecainide blood levels were undetectable (<0.05 mg/L).[3]

Eight breastfed infants of mothers taking flecainide were followed after safety inquiries by their mothers. The extent of breastfeeding was exclusive in 2 infants, mixed in 5 and unknown in 1. The median maternal flecainide dose was 150 mg (IQR 100 to 175 mg). Serum flecainide concentrations at day 15 were below the lower limit of detection (limit not stated) in all the infants.[5,6]

A woman was maintained on flecainide 200 mg daily throughout pregnancy and postpartum. The infant was exclusively breastfed until 3 weeks postpartum when mastitis resulted in bottle feeding with pumped breastmilk at first, until production was reduced to only two bottles of breastmilk in the morning, with a total volume of 66 ml/kg daily day at 30 days postpartum. Random infant serum flecainide concentrations at 5, 7 and 20 days postpartum were all below the lower level of quantification (<130 mcg/L).[4]

### Effects in Breastfed Infants

A woman with ventricular arrhythmia was treated with flecainide 87.3 mg twice daily during pregnancy and postpartum and exclusively breastfed her infant. Her infant was followed weekly with electrocardiograms until about 6 months of age. All were normal.[3]

Eight breastfed infants of mothers taking flecainide were followed after inquiries by their mothers. The extent of breastfeeding was exclusive in 2 infants, mixed in five and unknown in one. The median maternal flecainide dose was 150 mg (IQR 100 to 175 mg). Clinical examination at day 15 of life was normal in all infants, electrocardiograms in 2 were normal, and none of the 8 infants had an adverse effect. Two children who breastfed for 5 and 8 months, were healthy and developed normally at 1 and 2 years of age, respectively.[5,6]

A woman was maintained on flecainide 200 mg daily throughout pregnancy and postpartum. Her infant was exclusively breastfed until 3 weeks postpartum when mastitis resulted in bottle feeding with pumped breastmilk at first, until production was reduced to only two bottles of breastmilk in the morning, with a total volume of 66 ml/kg daily day at 30 days postpartum. Examination of the infant was performed at 5, 7, and 30 days of age. Physical examination of the heart, lungs, and abdomen was normal. Electrocardiography was normal at all times. The child was reportedly in good condition at 2 years of age.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Wagner X, Jouglard J, Moulin M, . Coadministration of flecainide acetate and sotalol during pregnancy: Lack of teratogenic effects, passage across the placenta, and excretion in human breast milk. Am Heart J 1990;119:700-2.1689933
2 McQuinn RL, Pisani A, Wafa S, . Flecainide excretion in human breast milk. Clin Pharmacol Ther 1990;48:262-7.2119270
3 van der Zande JA, Cornette JMJ, Roos-Hesselink JW, . Maternal, fetal, neonatal and breastmilk flecainide concentration during maternal therapy and lactation: a case report. Int Breastfeed J 2023;18:21.37060099
4 Willems L, van der Heijden H, van Osch F, . Effects of maternal flecainide use in the nursed infant-a case report. J Hum Lact 2026:8903344261452630.
5 Pizzoglio V, Auffret M, Vial T, . Follow-up of flecainide breastfed infants. Fundam Clin Pharmacol 2023;37:143-4. doi:10.1111/fcp.12908
6 Pizzoglio V, Auffret M, Vial T, . Follow-up of breastfed infants exposed to maternal flecainide treatment. Neurotoxicol Teratol 2023;98:30. doi:10.1016/j.ntt.2023.107247

## Substance Identification

### Substance Name

Flecainide

### CAS Registry Number

54143-55-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics